# X-Rays

## Drug Levels and Effects

### Summary of Use during Lactation

X-rays used to obtain dental images, x-rays of broken bones, chest x-rays, etc. are a form of electromagnetic radiation similar to light, but with a shorter wavelength. X-rays are present only during the time that the image is being taken and leave no radiation or radioactivity in the body or in milk. Diagnostic X-rays have no known effect on the milk in the breast at the time of imaging, nor on milk production. No special precautions are required.[1]

For information on contrast media used with x-rays, see the LactMed entry for the specific contrast agent. For information on high-dose therapeutic radiation, see the LactMed record on Radiotherapy.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Groen RS, Bae JY, Lim KJ. Fear of the unknown: Ionizing radiation exposure during pregnancy. Am J Obstet Gynecol 2012;206:456-62.22244469

## Substance Identification

### Substance Name

X-Rays

### Drug Class

Breast Feeding

Lactation

Milk, Human

Diagnostic Imaging

Radiation